# Gentian Violet

CASRN: 548-62-9

## Drug Levels and Effects

### Summary of Use during Lactation

Gentian violet (crystal violet) was used in the past to treat oral and nipple thrush during breastfeeding. Gentian violet is potentially toxic to the mucous membranes, causing oral ulceration with partial airway obstruction in one case,[1-6] and potentially tattooing the skin. It can also interact with DNA,[7] is carcinogenic and mutagenic in animals, and occasionally causes allergic sensitization, with cross-reactions to other triphenylmethane dyes.[8] Its use has been severely curtailed by authorities in Australia, Canada, England and France.[9-11] It is also very messy, staining skin and clothing. A 2001 survey of the members of the Academy of Breastfeeding Medicine (ABM) found that gentian violet is rarely (1 to 2% of respondents) used by breastfeeding experts for initial treatment of oral thrush and is very infrequently (3 to 4% of respondents) used for recurrent or persistent thrush.[10] ABM guidelines for treating Candida infection of the nipples state that an aqueous solution of gentian violet of less than 0.5% can be used for no more than 7 days on the nipple.[9] However, safer alternatives for treating thrush are available.[12]

### Effects in Breastfed Infants

Gentian violet has caused oral ulceration in breastfed infants treated with 1% or 2% solution applied to the mouth and tongue for thrush.[3-5]

A 2-week-old exclusively breastfed infant was treated for oral thrush with aqueous 1% gentian violet solution twice daily for 1 day. The parents discontinued it because they thought it was causing airway discomfort. After 2 days, it was restarted at 4 times a day. Cough and difficulty feeding developed after 1 day and the infant was then admitted to the hospital, ultimately requiring intubation.[6]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Clotrimazole, Fluconazole, Miconazole, Nystatin

### References

1 Slotkowski EL. Formation of mucous membrane lesions secondary to prolonged use of one per cent aqueous gentian violet. J Pediatr 1957;51:652-4.13481803
2 John RW. Necrosis of oral mucosa after local application of crystal violet. Br Med J 1968;1:157-8.20791427
3 Björnberg A, Mobacken H. Necrotic skin reactions caused by 1 per cent gentian violet and brilliant green. Acta Derm Venereol 1972;52:55-60.4111108
4 Utter AR. Gentian violet and thrush. J Hum Lact 1992;8:6.1558661
5 Utter AR. Gentian violet treatment for thrush: Can its use cause breastfeeding problems. J Hum Lact 1990;6:178-80.2271112
6 Baca D, Drexler C, Cullen E. Obstructive laryngotracheitis secondary to gentian violet exposure. Clin Pediatr (Phila) 2001;40:233-5.11336425
7 Rosenkranz HS, Carr HS. Possible hazard in use of gentian violet. Br Med J 1971;3:702-3.5569557
8 Bielicky T, Novak M. Contact-group sensitization to triphenylmethane dyes. Gentian violet, brilliant green, and malachite green. Arch Dermatol 1969;100:540-3.5350405
9 Berens P, Eglash A, Malloy M, et al. ABM Clinical Protocol #26: Persistent pain with breastfeeding. Breastfeed Med 2016;11:46-53.26881962
10 Brent NB. Thrush in the breastfeeding dyad: Results of a survey on diagnosis and treatment. Clin Pediatr (Phila) 2001;40:503-6.11583049
11 Anon. Gentian violet when breastfeeding: Irritant and carcinogenic. Prescrire Int 2020;29:243.
12 Stoukides C. Topical medications and breastfeeding. J Hum Lact 1993;9:185-7.8260040

## Substance Identification

### Substance Name

Gentian Violet

### CAS Registry Number

548-62-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents, Local